# Sodium Phosphate

CASRN: 7558-79-4; 7558-80-7

## Drug Levels and Effects

### Summary of Use during Lactation

Phosphate is a normal constituent of breastmilk. Phosphate concentrations have not been measured in breastmilk after large maternal doses of sodium phosphate, such a 30 gram oral dose for pre-procedural bowel evacuation. However, the added phosphate in breastmilk is likely to be only about 130 mg over 24 hours in this situation. The increase from a typical dose of a rectal enema would be considerably less than this amount. Breastmilk sodium concentration is tightly regulated, and will not be affected. It is probably not necessary to suspend breastfeeding after the use of oral sodium phosphate solutions given once or twice for bowel evacuation before a procedure. Use of a phosphate rectal enema by a nursing mother would require no special precautions.

### Drug Levels

Phosphate is a normal constituent of breastmilk.[1,2] Infants normally receive about 130 mg of inorganic phosphate daily from breastmilk.[2]

Maternal Levels. Administration of a 30 gram dose of oral sodium phosphate solution (e.g., Visicol) approximately doubles the maternal serum phosphate concentration, with serum concentrations returning to baseline about 24 hours after the dose.[3,4] Assuming breastmilk phosphate concentration also doubles, the increased phosphate dose to the infant would be only 130 mg for one day.

Administration of a phosphate enema (2 Fleet Enemas, containing a total of 14 grams of sodium phosphate dibasic and 38 grams of sodium phosphate monobasic) to 33 subjects increased serum phosphate by an average of about 25% (range 0.1 to 2.5 mg/dL).[5] In one other patient, a phosphate enema (Practo Clyss 120, containing a total of 7.2 grams of sodium phosphate dibasic and 19.2 grams of sodium phosphate monobasic) increased serum phosphate by 35% (by 0.8 mmol/L) after a single dose.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kent JC, Arthur PG, Retallack RW, et al. (1992). Calcium, phosphate and citrate in human milk at initiation of lactation. J Dairy Res.
2 Allen JC, Keller RP, Archer P, et al. (1991). Studies in human lactation: Milk composition and daily secretion rates of macronutrients in the first year of lactation. Am J Clin Nutr.
3 Visicol package insert. Salix Pharmaceuticals, Inc; December 2010.
4 Ehrenpreis ED. (2009). Increased serum phosphate levels and calcium fluxes are seen in smaller individuals after a single dose of sodium phosphate colon cleansing solution: a pharmacokinetic analysis. Aliment Pharmacol Ther.
5 Schuchmann GD, Barcia PJ. (1989). Phosphate absorption from fleet enemas in adults. Curr Surg.
6 Rimensberger P, Schubiger G, Willi U. (1992). Connatal rickets following repeated administration of phosphate enemas in pregnancy: a case report. Eur J Pediatr.

## Substance Identification

### Substance Name

Sodium Phosphate

### CAS Registry Number

7558-79-4; 7558-80-7

### Drug Class

Breast Feeding

Lactation

Cathartics

Electrolyte

Gastrointestinal Agents

Minerals